# Venlafaxine

CASRN: 93413-69-5

## Drug Levels and Effects

### Summary of Use during Lactation

Infants receive venlafaxine and its active metabolite in breastmilk, and the metabolite of the drug can be found in the plasma of most breastfed infants; however, concurrent side effects have rarely been reported. Some experts feel that venlafaxine is not recommended during nursing.[1] Breastfed infants, especially newborn or preterm infants, should be monitored for excessive sedation and adequate weight gain if this drug is used during lactation, possibly including measurement of serum levels of desvenlafaxine (O-desmethylvenlafaxine), to rule out toxicity if there is a concern. Maternal poor metabolism by metabolic enzymes does not appear to result in excessive infant serum concentrations. Bruxism was reported in one infant.

However, newborn infants of mothers who took the drug during pregnancy may experience poor neonatal adaptation syndrome as seen with other antidepressants such as SSRIs or SNRIs. Breastfed infants exposed to venlafaxine during the third trimester of pregnancy are at risk for neonatal withdrawal syndrome consisting of hypoglycemia, tremors, tachycardia, or hypotonia, and might be at a greater risk of readmission due to jaundice.[2,3] Use of venlafaxine during breastfeeding has been proposed as a method of mitigating infant venlafaxine withdrawal symptoms, and institution of maternal milk feeding of mothers taking venlafaxine has reversed symptoms of neonatal abstinence.[4-6]

### Drug Levels

Venlafaxine is metabolized to a metabolite, desvenlafaxine, that has antidepressant activity similar to that of venlafaxine.[7]

Maternal Levels. Three mothers with infants aged 0.37, 1.3 and 6 months were taking venlafaxine in doses of 3.04 to 8.18 mg/kg daily for at least a week. Peak breastmilk levels of venlafaxine and its active metabolite, desvenlafaxine, occurred 1 to 3 hours after the dose in 2 of the mothers. Infants received an average of 7.6% (range 4.7 to 9.2%) of the maternal weight-adjusted dosage of venlafaxine plus desvenlafaxine.[8]

Six women averaging 7 months postpartum were receiving venlafaxine 225 to 300 mg daily for at least 18 days; 1 was taking the sustained-release (SR) formulation once daily and the others took 2 divided doses daily. In the women taking immediate-release product, the time of the peak milk levels averaged 2 hours (range 1.7 to 2.8 hours) for venlafaxine and 2.8 hours (range 1.8 to 4.2 hours) for desvenlafaxine. For the SR formulation, peak venlafaxine and desvenlafaxine levels occurred at 5.7 and 7.7 hours, respectively. The authors estimated that an exclusively breastfed infant would receive an average of 6.4% (range 5.2 to 7.4%) of the maternal weight-adjusted dosage of venlafaxine as the drug plus metabolite.[9]

Three women were taking venlafaxine during breastfeeding in doses of 37.5, 75 and 225 mg daily. Milk samples were taken 8 hours after a dose and measured for venlafaxine and desvenlafaxine. The infants were estimated to have received 11.8%, 3% and 6.3% of the weight-adjusted maternal dosage.[10]

In 3 women 8 to 30 weeks postpartum who were taking venlafaxine 75 to 225 mg daily, the authors calculated that their fully breastfed infants would receive an average of 5.2% of the maternal dosage, primarily as desvenlafaxine.[11]

A woman who was taking venlafaxine 375 mg daily during pregnancy and postpartum had a combined breastmilk level of 690 mcg/L of venlafaxine and 2 metabolites. The authors estimated that the breastfed infant was receiving at least 3.5% of the maternal weight-adjusted dosage.[4]

Two women who were 6.5 and 9.5 weeks postpartum and taking venlafaxine 75 mg and 225 mg daily had their milk measured at unreported times after their doses. The venlafaxine concentrations in their milk were 103 and 327 mcg/L, respectively.[12]

Eleven women taking an average of 194 mg of venlafaxine daily (1 as immediate-release and 10 as sustained-release) had their breastmilk venlafaxine and desvenlafaxine concentrations measured. The estimated excretion of the drug and metabolite into breastmilk was 8.1% (range 3.2 to 13.3%) of the weight-adjusted maternal dosage. The peak drug concentration in breastmilk occurred at about 8 hours after the dose; desvenlafaxine was the primary contributor to total milk concentration. The estimated infant dosage was 0.208 mg/kg daily (range 0.07 to 0.38 mg/kg daily),[13] which translates to 6.4% of the maternal weight-adjusted dosage.

A woman treated with venlafaxine 75 mg daily during the third trimester of pregnancy and during breastfeeding provided a trough milk samples during the first week postpartum. The milk level was 461 mg/L, with a calculated weight-adjusted percentage of maternal dosage of 8.8%. This value might be inaccurate because of the timing of sample collection.[14]

Random milk samples were obtained from 5 women taking a median dosage of 75 mg (range 37.5 to 150 mg) of venlafaxine daily had a median venlafaxine milk concentration of 102 mcg/L (range 7.5 to 568 mcg/L) and a median desvenlafaxine milk concentration of 371 (range 72 to 1031 mcg/L). The authors calculated that this represents a combined median infant dosage of 77 (range 12 to 163) mcg/kg daily of the two drugs.[15]

A woman was taking venlafaxine 75 mg daily during pregnancy and postpartum. Trough milk samples were taken before her dose on several occasions over a 1-year period. At delivery, her colostrum venlafaxine and desvenlafaxine concentrations were 34 and 428 mcg/L, respectively. At 10 days postpartum, milk concentrations were 168 and 13 mcg/L, respectively. At 2 months postpartum, milk concentrations were 144 and 442 mcg/L, respectively. At 6 months postpartum, milk concentrations were 171 and 606 mcg/L, respectively. At 12 months postpartum, milk concentrations were 96 and 319 mcg/L, respectively.[16]

A physiologically based pharmacokinetic model was used to predict nursing infant exposure to venlafaxine and O-desmethylvenlafaxine under several maternal genetic conditions. Using peak milk levels (i.e., worst-case scenario) the estimated RIDs were1.7% for CYP2D6 extensive metabolizers, 6.6% for poor metabolizers (PMs), and 10.3% for PMs of all of the phenotypes CYP2D6, 2C9 and 2C19. Nevertheless, the estimated infant daily dose remained substantially below the toxic threshold level of 10 mg/kg identified in a previous study.[17]

Infant Levels. Three breastfed (extent not stated) infants aged 0.37, 1.3 and 6 months whose mothers were taking venlafaxine 3.04 to 8.18 mg/kg daily had undetectable (<10 mcg/L) venlafaxine and an average of 100 mcg/L (range 23 to 225 mcg/L) of desvenlafaxine in their plasma.[8]

Two mothers on stable doses of venlafaxine 75 and 150 mg daily exclusively breastfed their infants for 6 months. At ages 3 and 4 weeks, respectively, venlafaxine was undetectable (<10 mcg/L) in the serum of both infants. Desvenlafaxine was detectable in their serum at 16 and 21 mcg/L, respectively.[18]

Three breastfed (extent not stated) infants whose mothers were taking venlafaxine 37.5, 75 and 225 mg daily had blood samples taken 8 hours after the previous maternal dose. The infants, whose ages were 3, 10.4 and 14.6 weeks, had venlafaxine serum levels of 9 mcg/L, <3 mcg/L and undetectable; desvenlafaxine serum levels were <8, 7.5 and 12.5 mcg/L, respectively.[10]

Of 7 breastfed (extent not stated) infants with an average age of 7 months, including 1 set of twins, whose mothers were taking 225 to 300 mg of venlafaxine daily, only 1 (maternal dose 225 mg daily) had a measurable serum level of venlafaxine of 5 mcg/L (detection limit 1 mcg/L). Measurable desvenlafaxine serum levels were 3, 6, 20 and 38 mcg/L in 4 of the 7 infants.[9]

In 3 breastfed (extent not stated) infants aged 8 to 30 weeks whose mothers were taking venlafaxine 75 to 225 mg daily, their serum drug levels were 10.2% of those of their mothers, mostly as desvenlafaxine.[11]

Six nursing infants (average 20 weeks; range 7.3 to 60 weeks of age) whose mothers were taking an average of 206 mg daily of venlafaxine had their serum analyzed for venlafaxine and desvenlafaxine. Five were exclusively breastfed and 1 was about 50% breastfed. Five of the 6 had no detectable (<2 mcg/L) venlafaxine in their serum, and 1 had a concentration of 5 mcg/L. Two infants, including the one who was partially breastfed had no detectable desvenlafaxine in their serum; the other 4 had desvenlafaxine concentrations ranging from 4 to 243 mcg/L. This group of 4 infants had an average serum concentrations of the drug and metabolite of 37% that of their mothers’ serum.[13]

A 7-day-old infant with apparent toxicity from breastmilk ingestion had blood venlafaxine and desvenlafaxine concentrations were 1.5 mcg/L and 9.2 mcg/L, respectively. Her mother was taking a daily dose of 150 mg of venlafaxine.[19]

A woman was taking venlafaxine 75 mg daily during pregnancy and postpartum. She breastfed her infant (extent not stated) for at least 12 months. Infant serum samples were taken on several occasions over a 1-year period. At delivery, the infant had serum venlafaxine and desvenlafaxine concentrations of 13 and 172 mcg/L, respectively. Serum concentrations decreased progressively to <5 and 16 mcg/L at 2 months of age and <5 + 6 mcg/L at 12 months of age.[16]

### Effects in Breastfed Infants

No acute adverse effects or abnormal weight gain were seen in 3 breastfed infants who had detectable serum levels of desvenlafaxine.[8]

No adverse effects on growth or in sleep, feeding or behavioral patterns were noticed clinically in 2 infants who were exclusively breastfed for 6 months during maternal therapy with venlafaxine 75 and 150 mg daily.[18]

Three mothers took an average venlafaxine dose of 162.5 mg once daily. They breastfed their infants exclusively for 4 months and at least 50% during months 5 and 6. Their infants had 6-month weight gains that were normal according to national growth standards.[20]

Seven infants (including 1 set of twins) breastfed for 2.7 to 10.3 months during maternal venlafaxine therapy. Three mothers were taking venlafaxine since birth and 3 were started later. Denver Developmental Screening Tests in all infants were normal. All but 2 had normal growth; these 2 had decreased weight gain.[9]

In 3 infants aged 8 to 30 weeks whose mothers were taking venlafaxine 75 to 225 mg daily, no adverse reactions were noted clinically at the time of the study.[11]

A newborn infant whose mother had been taking venlafaxine 375 mg daily during pregnancy had symptoms of lethargy, poor sucking ability, and dehydration at 2 days of age. The infant was allowed to breastfeed, and the symptoms subsided over 1 week. The authors concluded that the symptoms were most likely withdrawal symptoms that were mitigated by the venlafaxine in breastmilk.[1] Another infant whose mother was taking venlafaxine 300 mg daily was reported by the same center. In this case, the infant’s symptoms of withdrawal improved markedly on day 7 when breastfeeding was initiated, but no drugs levels were measured in milk or in the infant.[5]

Two nursing mothers were taking venlafaxine and quetiapine for postpartum depression; one was also taking trazodone. Their breastfed infants’ development was assessed at 12 to13 months of age with the Bayley Scales. Scores were within normal limits on the mental, psychomotor and behavior scales.[21]

Thirteen infants whose mothers were taking venlafaxine in doses ranging from 37.5 to 300 mg daily were breastfed (11 exclusively and 2 about 50%). Three of the infants were also exposed to a second psychotropic drug in breastmilk: 1 each of buspirone, trazodone, and quetiapine. None of the infants had any adverse reactions reported by their mothers or in their medical records.[13]

Two nursing mothers who were 6.5 and 9.5 weeks postpartum were taking venlafaxine in doses of 75 and 225 mg daily, respectively, in addition to quetiapine for major depression postpartum; one mother was also taking trazodone. Their breastfed infants’ development were assessed at 9 to 18 months of age with the Bayley Scales. Both infants had scores that were within normal limits.[12]

A mother was taking venlafaxine 75 mg daily for depression and anxiety, although when the drug was started is not clear from the report. Her 1-month-old infant was seen in a pediatric clinic and was demonstrating agitation, infantile colic, drowsiness, increased startle response, jitteriness and sleeplessness. The symptoms began at 1 week of age and became progressively worse over time and with breastfeeding. The symptoms were possibly caused by venlafaxine, although whether they represent a withdrawal reaction of direct drug effects cannot be determined.[22]

A woman with depression and anxiety was treated with venlafaxine 300 mg daily monotherapy beginning at 20 weeks of pregnancy. On day three of life, the infant had extensor posturing and cycling of the limbs which was thought to be seizure related. Clinical examination was normal. Her suck was noted to be strong but uncoordinated and the infant fatigued rapidly. The infant was partially breastfed initially, but when breastmilk feeding was discontinued, the infant’s alertness improved, and she gained 314 grams over 7 days. The authors felt that venlafaxine in breastmilk might have contributed to the infant’s lethargy, especially given the high maternal dosage. The symptoms were possibly caused by venlafaxine in breastmilk.[23]

A woman was treated with venlafaxine 75 mg daily during the third trimester of pregnancy and during breastfeeding. Pediatric evaluation including neurologic assessment and brain ultrasound were conducted during the first 24 hours postpartum. Further follow-up was conducted at 6 or more months of age. The infant’s clinical status was comparable to unexposed infants from the same pediatric department.[14]

A woman taking venlafaxine 150 mg daily noticed that her infant was difficult to rouse and breastfed poorly. She stated that breastfeeding was frequently interrupted by apparent infant distress and easy fatigability. At 7 days of age, the mother sought medical attention. On admission to the ICU, the infant was somnolent, difficult to rouse and hypotonic. The infant’s weight was 3080 grams, with an average weight gain of 12 grams daily. On day 8, formula was substituted for breastfeeding with an improvement in alertness and weight gain. Although the infant’s serum venlafaxine and desvenlafaxine were relatively low, the infant’s symptoms were probably related to the drugs in milk.[19]

A woman was taking venlafaxine 75 mg daily during pregnancy and postpartum. She breastfed her infant (extent not stated) for at least 12 months. During the 1-year follow-up, no symptoms related to venlafaxine toxicity were observed in the infant and neurological development and weight and height were age-appropriate.[16]

Two formula-fed neonates developed hypotonia, hypoglycemia, bradycardia, irritability, and hypothermia within 5 days of birth. All causes were ruled out, except their mothers had been taking venlafaxine during pregnancy. Institution of maternal breastmilk feeding resulted in resolution of all symptoms, indicating that the symptoms were a neonatal abstinence syndrome to venlafaxine.[6]

### Effects on Lactation and Breastmilk

Cases of galactorrhea and elevated serum prolactin have been reported in which venlafaxine played a primary or secondary role in the etiology.[21,24-31] Galactorrhea with normal prolactin levels has also been reported.[32] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

One mother who was nursing a 10.3-month-old infant reported that her milk letdown took longer after starting venlafaxine 1 month earlier.[9]

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[33] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575; venlafaxine n = 68) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[34]

A woman with chronic depression was treated throughout pregnancy with extended-release venlafaxine 225 mg daily. She gave birth by cesarean section at 36.5 weeks and began to breastfeed her infant. The infant was not nursing adequately, but the mother pumped milk after each feeding and used it to supplement the infant. It was estimated that she was producing at least 900 mL of milk daily. By 8 days postpartum, she began to experience depression and aripiprazole 2 mg daily, which she had taken before pregnancy, was added to her regimen. After 3 days of combined therapy, she noticed a decrease in milk supply, and withing 21 days, lactation had ceased completely. Either aripiprazole or the combination with venlafaxine possibly caused a decrease in milk supply.[35]

A 22-year-old woman who had been taking slow-release venlafaxine 150 mg daily for 3 months reported bilateral breast engorgement and galactorrhea for 3 days after being prescribed cefpodoxime 200 mg twice daily for 14 days 2 weeks prior. Laboratory and head CT results were normal except for a slight elevation in alkaline phosphatase and an elevated serum prolactin level. Her galactorrhea began decreasing within 2 weeks and disappeared in 3 weeks with no change in venlafaxine dosage. Her serum prolactin level also returned to normal. The authors felt that her symptoms and hyperprolactinemia were probably caused by cefpodoxime.[36]

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[37]

### Alternate Drugs to Consider

Desvenlafaxine, Nortriptyline, Paroxetine, Sertraline

### References

1 Larsen ER, Damkier P, Pedersen LH, . Use of psychotropic drugs during pregnancy and breast-feeding. Acta Psychiatr Scand Suppl 2015;445:1-28.
2 Wang J, Cosci F. Neonatal withdrawal syndrome following late in utero exposure to selective serotonin reuptake inhibitors: A systematic review and meta-analysis of observational studies. Psychother Psychosom 2021;90:299-307.33971648
3 Cantin C, Li W, Snelgrove-Clarke E, . Examining the effect of newborn feeding method on postnatal length of stay and healthcare utilisation among Neonates With In-utero SSRI Exposure (NeoWISE): a retrospective cohort study. BMJ Paediatr Open 2026;10
4 Koren G, Moretti M, Kapur B. Can venlafaxine in breast milk attenuate the norepinephrine and serotonin reuptake neonatal withdrawal syndrome. J Obstet Gynaecol Can 2006;28:299-301.16776907
5 Boucher N, Koren G, Beaulac-Baillargeon L. Maternal use of venlafaxine near term: Correlation between neonatal effects and plasma concentrations. Ther Drug Monit 2009;31:404-9.19455083
6 Oswald M, El-Chaar G, Canter M. Hypothermia as a presenting sign of venlafaxine-induced neonatal abstinence syndrome in 2 neonates. J Pediatr Pharmacol Ther 2024;29:654-9.39659866
7 Weissman AM, Levy BT, Hartz AJ, . Pooled analysis of antidepressant levels in lactating mothers, breast milk, and nursing infants. Am J Psychiatry 2004;161:1066-78.15169695
8 Ilett KF, Hackett LP, Dusci LJ, . Distribution and excretion of venlafaxine and O-desmethylvenlafaxine in human milk. Br J Clin Pharmacol 1998;45:459-62.9643618
9 Ilett KF, Kristensen JH, Hackett LP, . Distribution of venlafaxine and its O-desmethyl metabolite in human milk and their effects in breastfed infants. Br J Clin Pharmacol 2002;53:17-22.11849190
10 Weissman AM, Wisner KL, Perel JM, . Venlafaxine levels in lactating mothers, breast milk, and nursing infants. Arch Womens Ment Health 2003;6 (Suppl 1):20. doi:10.1007/s00737-002-0163-1
11 Berle JØ, Steen VM, Aamo TO, . Breastfeeding during maternal antidepressant treatment with serotonin reuptake inhibitors: Infant exposure, clinical symptoms, and cytochrome P450 genotypes. J Clin Psychiatry 2004;65:1228-34.15367050
12 Misri S, Corral M, Wardrop AA, . Quetiapine augmentation in lactation: A series of case reports. J Clin Psychopharmacol 2006;26:508-11.16974194
13 Newport DJ, Ritchie JC, Knight BT, . Venlafaxine in human breast milk and nursing infant plasma: Determination of exposure. J Clin Psychiatry 2009;70:1304-10.19607765
14 Pogliani L, Baldelli S, Cattaneo D, . Selective serotonin reuptake inhibitors passage into human milk of lactating women. J Matern Fetal Neonatal Med 2019;32:3020-5.29557689
15 Schoretsanitis G, Augustin M, Sassmannshausen H, . Antidepressants in breast milk; Comparative analysis of excretion ratios. Arch Womens Ment Health 2019;22:383-90.30116895
16 Baldelli S, Pogliani L, Schneider L, . Passage of venlafaxine in human milk during 12 months of lactation: A case report. Ther Drug Monit 2022;44:707-8.36101929
17 Pan X, Rowland Yeo K. Advancing inclusive healthcare through PBPK modelling: Predicting the impact of CYP genotypes and enzyme ontogenies on infant exposures of venlafaxine and its active metabolite O-desmethylvenlafaxine in lactation. J Pharmacokinet Pharmacodyn 2025;52:22.40185984
18 Hendrick V, Altshuler L, Wertheimer A, . Venlafaxine and breast-feeding. Am J Psychiatry 2001;158:2089-90.
19 Eleftheriou G, Butera Raffaella, Gallo Mariapina, . Breastfeeding during venlafaxine therapy: A case report of neonatal toxicity. Clin Toxicol 2022;60 (Sp. Iss. SI):58. doi:10.1080/15563650.2022.2054576
20 Hendrick V, Smith LM, Hwang S, . Weight gain in breastfed infants of mothers taking antidepressant medications. J Clin Psychiatry 2003;64:410-2.12716242
21 Pae CU, Kim JJ, Lee CU, . Very low dose quetiapine-induced galactorrhea in combination with venlafaxine. Hum Psychopharmacol 2004;19:433-4.15303249
22 Matthys A, Ambat MT, Pooh R, . Psychotropic medication use during pregnancy and lactation: Role of ultrasound assessment. Donald Sch J Ultrasound Obstet Gynecol 2014;8:109-21. doi:10.5005/jp-journals-10009-1345
23 Tran MM, Fancourt N, Ging JM, . Failure to thrive potentially secondary to maternal venlafaxine use. Australas Psychiatry 2016;24:98-9.26850953
24 Bhatia SC, Bhatia SK, Bencomo L. Effective treatment of venlafaxine-induced noncyclical mastalgia with bromocriptine. J Clin Psychopharmacol 2000;20:590-1.11001253
25 Sternbach H. Venlafaxine-induced galactorrhea. J Clin Psychopharmacol 2003;23:109-10.12544389
26 Ashton AK, Longdon MC. Hyperprolactinemia and galactorrhea induced by serotonin and norepinephrine reuptake inhibiting antidepressants. Am J Psychiatry 2007;164:1121-2.
27 Wichman CL, Cunningham JL. A case of venlafaxine-induced galactorrhea? J Clin Psychopharmacol 2008;28:580-1.18794664
28 Karakurt F, Kargili A, Uz B, . Venlafaxine-induced gynecomastia in a young patient: A case report. Clin Neuropharmacol 2009;32:51-2.18978497
29 Berilgen MS. Late-onset galactorrhea and menometrorrhagia with venlafaxine use in a migraine patient. J Clin Psychopharmacol 2010;30:753-4.21057247
30 Suthar N, Pareek V, Nebhinani N, . Galactorrhea with antidepressants: A case series. Indian J Psychiatry 2018;60:145-6.29736080
31 Kameg BN, Wilson R. Venlafaxine-related galactorrhea in an adolescent female: A case report. Arch Psychiatr Nurs 2022;40:106-8.36064232
32 Warren MB. Venlafaxine-associated euprolactinemic galactorrhea and hypersexuality: A case report and review of the literature. J Clin Psychopharmacol 2016;36:399-400.27219091
33 Venkatesh KK, Castro VM, Perlis RH, . Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
34 Leggett C, Costi L, Morrison JL, . Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
35 Walker T, Coursey C, Duffus ALJ. Low dose of Abilify (aripiprazole) in combination with Effexor XR (venlafaxine HCl) resulted in cessation of lactation. Clin Lact (Amarillo) 2019;10:56-9. doi:10.1891/2158-0782.10.2.56
36 Das N, Chadda RK. Hyperprolactinemic galactorrhea associated with cefpodoxime in a patient with recurrent depressive disorder on venlafaxine monotherapy: A case report. J Clin Psychopharmacol 2020;40:635-6.33065718
37 Grzeskowiak LE, Saha MR, Nordeng H, . Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Venlafaxine

### CAS Registry Number

93413-69-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Serotonin-Norepinephrine Reuptake Inhibitors